# Xylometazoline

CASRN: 526-36-3

## Drug Levels and Effects

### Summary of Use during Lactation

Xylometazoline is no longer marketed in the United States. Although no information exists on the use of xylometazoline specifically during breastfeeding, very little should reach the infant through breastmilk because of the local administration and limited absorption into the maternal bloodstream. It is recommended over oral systemic decongestants such as pseudoephedrine during breastfeeding.[1]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Anderson PO. Decongestants and milk production. J Hum Lact 2000;16:294.11155604

## Substance Identification

### Substance Name

Xylometazoline

### CAS Registry Number

526-36-3

### Drug Class

Breast Feeding

Lactation

Milk, Human

Adrenergic alpha-Agonists

Sympathomimetics

Nasal Decongestants